# Penicillin V

CASRN: 87-08-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that penicillin V produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Penicillin V is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Milk penicillin V levels were measured in 16 women after an oral dose of 1320 mg. In 7 women with mastitis, peak milk levels averaged 0.72 mg/L in the breast with mastitis and 0.58 mg/L without mastitis. In 4 women without mastitis (control), peak milk levels averaged 0.3 mg/L. Differences in the levels in mastitic milk and control milk were statistically significantly from nonmastitic milk in the women with mastitis in the opposite breast. In the women with mastitis, the peak level occurred 2.6 to 2.7 hours after the dose; in the women without mastitis, the peak occurred 5.4 hours after the dose. The average milk concentration and areas under the curve were greater in the women with mastitis, but the differences were not statistically significant. The authors estimated that an exclusively breastfed infant would receive an average daily dosage of about 50 mcg/kg (range 20 to 90 mcg/kg).[1]

Infant Levels. Nursing mothers were given a single oral dose of 1320 mg of penicillin V. In two of the infants who were breastfed, urine penicillin V was measured 2 hours after nursing. In one it was undetectable and in the other, the urine concentration was 520 mcg/L.[1]

### Effects in Breastfed Infants

In one study, 12 infants were breastfed during maternal penicillin V therapy. Seven appeared normal, 3 had looser stools than normal, and 1 had a rash on the buttocks on the last day of therapy. These effects were possibly related to penicillin V in milk, but no control group was present. One infant had stains of blood in the stool, but it had happened once prior to maternal penicillin V treatment.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Matheson I, Samseth M, Loberg R, et al. (1988). Milk transfer of phenoxymethylpenicillin during puerperal mastitis. Br J Clin Pharmacol.

## Substance Identification

### Substance Name

Penicillin V

### CAS Registry Number

87-08-1

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antibacterial Agents

Penicillins